# Amiodarone

CASRN: 1951-25-3

## Drug Levels and Effects

### Summary of Use during Lactation

Breastmilk and infant serum levels of amiodarone and its active metabolite are somewhat unpredictable, but can be high during breastfeeding. The infant receives an estimated dose of amiodarone plus desethylamiodarone ranging from 3.5 to 45% of the mother's weight-adjusted amiodarone dose, with a median dose of about 11%.[1-4] Infant serum levels of the drug plus metabolite range from 14 to 74% of simultaneous maternal levels, with the higher values reflecting transplacental passage of the drug.[2-4] In addition to possible cardiac effects, these compounds contain a large amount of iodine which may be released during metabolism. Thyroid dysfunction was reported in one breastfed infant. Even if the drug were discontinued at birth, the mother would continue to excrete amiodarone and its metabolite (and possibly large amounts of iodine) into breastmilk for days to weeks.

Some investigators believe that breastfeeding can be undertaken during maternal amiodarone use with periodic monitoring of infant cardiac and thyroid function status,[5,6] especially if only a single dose of amiodarone is given.[7,8] Infant serum levels of amiodarone and desethylamiodarone may be useful for ruling out cardiac effects of the drug. If hypothyroidism develops, therapy should be promptly initiated.

### Drug Levels

Amiodarone is an iodine-containing compound that is active and is also metabolized to the active metabolite desethylamiodarone. Metabolism also releases 6 mg of free iodine for each 100 mg of amiodarone which can affect thyroid function. The drug has an exceptionally long half-life of 100 days in adults because of extensive storage in body fat. It requires weeks to months to attain steady state and to be cleared from the body.[6]

Maternal Levels. After having taken amiodarone 200 mg twice daily 5 days weekly for 4 years, the milk of a mother was completely expressed 4 times during the first 2 days postpartum. The average milk amiodarone concentration was 3.5 mg/L. The authors calculated that her infant would have received an average of 18% and a maximum of 26% of the maternal weight-adjusted dosage of amiodarone.[9]

A woman who took amiodarone with reducing doses of 600, 400 and 200 mg daily for one week at each dosage level during the last 3 weeks of pregnancy had milk amiodarone and desethylamiodarone levels of 0.5 to 1.8 mg/L and 0.4 to 0.8 mg/L, respectively, in 5 samples of colostrum obtained during days 2 and 3 postpartum.[1]

In a mother who took amiodarone 200 mg daily for the last 5 weeks of pregnancy and for one week after delivery, milk amiodarone and desethylamiodarone levels were 0.55 and 0.44 mg/L, respectively, at 4 weeks postpartum and 0.030 and 0.002 mg/L at 6 weeks postpartum.[3]

A mother who took amiodarone 200 mg daily throughout pregnancy and during breastfeeding had milk amiodarone and desethylamiodarone levels of 1.7 and 0.75 mg/L, respectively, 2 weeks postpartum and 3.0 and 1.8 mg/L 3 weeks postpartum.[3]

Another mother who took amiodarone 200 mg daily throughout pregnancy had milk amiodarone and desethylamiodarone levels of 2.2 and 0.77 mg/L, respectively, at birth. Her infant was breastfed, but no infant serum levels were measured.[3]

A woman who took amiodarone 400 mg daily from week 14 of pregnancy and throughout nursing had milk amiodarone levels that varied from 1.06 to 3.65 mg/L (average 2.52 mg/L) and milk desethylamiodarone levels that varied from 0.5 to 1.24 mg/L (average 0.9 mg/L) on 5 occasions during the month following delivery. Her breastfed infant's thyroid function tests remained normal.[4]

A woman who took amiodarone 800 mg daily for 1 week starting at week 34 of pregnancy, then 400 mg daily for the rest of her pregnancy and during breastfeeding had milk amiodarone levels that varied from 3.6 to 14.4 mg/L (average 10.4 mg/L) and milk desethylamiodarone levels that varied from 1.3 to 5.7 mg/L (average 4.1 mg/L) on days 9, 11 and 13 postpartum.[2]

A woman took amiodarone 200 mg three times daily for 11 days, then 200 mg twice daily during her pregnancy. She discontinued the drug at the time of delivery and breastfed her infant. The milk amiodarone level was 0.6 mg/L on day 5 and increased to 2.1 mg/L on day 11. The increase between days 5 and 11 could have been due to sampling times (fore- vs hindmilk) or because of an increase in fat content as lactation progressed. Amiodarone was undetectable in milk by day 25.[10]

A postpartum woman was given a single intravenous dose of amiodarone 450 mg for a tachyarrhythmia. Milk samples were collected 3, 4 and 10 days after the dose. At 3 days after the dose, the milk amiodarone concentration was about 185 mcg/L. On day 4, the milk concentration was 233 mcg/L and on day 10, it had fallen to 132 mcg/L. Desethylamiodarone concentrations were not reported. The author estimated that the amiodarone dose that a fully breastfed infant would receive would be 35 mcg/kg daily, which represents a maximum of 0.18% of the pediatric dosage or 0.6% of the weight-adjusted dose maternal dose.[8]

A woman with peripartum cardiomyopathy and severe nonsustained ventricular tachycardia gave birth to twins. Amiodarone was initiated on the second day after birth, initially intravenously, then orally and by intravenous drip until day 4 after birth for a total dosage of 1087 mg intravenously and 400 mg by mouth over the 4 days. Bisoprolol, edoxaban, vonoprazan, febuxostat, imidapril, and pitavastatin were also started postpartum. Two milk samples were collected at 14 and 39 days after the end of amiodarone therapy. On day 14, milk concentrations of amiodarone and its active metabolite mono-N-desethylamiodarone were 111 mcg/L and 143 mcg/L, respectively. On day 39, milk concentrations of amiodarone and its active metabolite mono-N-desethylamiodarone were 118 mcg/L and 36.6 mcg/L, respectively. From these points, the authors estimated the half-lives of amiodarone and mono-N-desethylamiodarone in breastmilk to be 7.8 and 12.6 days, respectively.[11]

Infant Levels. A mother took amiodarone 200 mg daily throughout pregnancy and during breastfeeding. Her breastfed infant had serum amiodarone and desethylamiodarone levels of 30 and 320 mcg/L (4.5 and 51% of maternal plasma levels), respectively, at 3 weeks postpartum.[3]

A mother took amiodarone 200 mg daily for the last 5 weeks of pregnancy and for one week after delivery. At 4 weeks postpartum, the breastfed infant's plasma amiodarone and desethylamiodarone levels were 10 and 160 mcg/L, respectively. At 6 weeks postpartum, her breastfed infant's drug and metabolite plasma levels were 10 and 30 mcg/L.[3]

A woman took amiodarone 400 mg daily from week 14 of pregnancy and throughout nursing. Her breastfed infant's serum amiodarone and desethylamiodarone levels were 200 and 50 mcg/L (60% and 14% of maternal levels), respectively, at one day of age and undetectable (<100 and <50 mcg/L, respectively) at 1 and 2 weeks of age.[3]

A woman took amiodarone 800 mg daily for 1 week starting at week 34 of pregnancy, then 400 mg daily for the rest of her pregnancy and during breastfeeding. Her breastfed infant's serum amiodarone level remained constant at 400 mcg/L (about 25% of maternal serum levels) during the first 9 weeks of life, while desethylamiodarone levels slowly decreased from 0.3 (22% of maternal serum levels) to 150 mcg/L (10% of maternal serum levels) during the same time period.[2]

One group reported amiodarone breastmilk levels in 2 patients. The first mother received a total of 7.6 grams of amiodarone over the first 7 days postpartum for ventricular tachycardia and ventricular fibrillation. She collected breastmilk samples between days 10 and 18 postpartum. Back-extrapolation of the sample values indicated an initial amiodarone concentration of 24.8 mg/L that fell with a half-life of 4.4 days. The second patient received a single amiodarone dose of 150 mg intravenously on day 1 postpartum. Breastmilk samples collected on days 4 and 5 postpartum contained amiodarone 0.19 mg/L and 0.17 mg/L, and desethylamiodarone, 0.084 mg/L and 0.085 mg/L, respectively. The authors concluded that breastmilk cessation is probably not necessary after a single dose of 150 mg.[7]

### Effects in Breastfed Infants

One mother took amiodarone during the last 5 weeks of pregnancy and until one week after delivery. She was also taking metoprolol throughout pregnancy and at the time of delivery. Possible signs of hypothyroidism occurred transiently in her breastfed infant at 9 and 24 days of age. This was possibly caused by amiodarone or iodine from amiodarone in breastmilk, although residual amiodarone from transplacental passage is also a possible contributing factor; no abnormalities in cornea or the lungs were found.[3]

A pair of twins was born to a woman who received a total of 1487 mg of amiodarone over the first 4 days postpartum. Breastfeeding began 35 days after the end of amiodarone administration when amiodarone and mono-N-desethylamiodarone were still measurable in milk. At that time, the daily intake of breastmilk was 160 mL for the first infant and 120 mL for the second, smaller infant. Breastmilk was mixed with infant formula and accounted for approximately one-quarter of their total daily milk intake. The mother breastfed in infants for approximately two months after starting breastfeeding. At 3 years of age, both infants had a tendency toward obesity, but no other complications or developmental delay.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date. However, if amiodarone causes hypothyroidism in the mother, her milk supply could be diminished.

### References

1 Pitcher D, Leather HM, Storey GC, et al. Amiodarone in pregnancy. Lancet 1983;321:597–8.6131292
2 McKenna WJ, Harris L, Rowland E, et al. Amiodarone therapy during pregnancy. Am J Cardiol 1983;51:1231–3.6837469
3 Plomp TA, Vulsma T, de Vijlder JJM. Use of amiodarone during pregnancy. Eur J Obstet Gynecol Reprod Biol 1992;43:201–7.1563571
4 Strunge P, Frandsen J, Andreasen F. Amiodarone during pregnancy. Eur Heart J 1988;9:106–9.3345766
5 Bartalena L, Bogazzi F, Braverman LE, et al. Effects of amiodarone administration during pregnancy on neonatal thyroid function and subsequent neurodevelopment. J Endocrinol Invest 2001;24:116–30.11263469
6 Basaria S, Cooper DS. Amiodarone and the thyroid. Am J Med 2005;118:706–14.15989900
7 Khurana R, Bin Jardan, YA, Wilkie J, et al. Breast milk concentrations of amiodarone, desethylamiodarone, and bisoprolol following short-term drug exposure: Two case reports. J Clin Pharmacol 2014;54:828–31.24482268
8 Javot L, Pape E, Yelehe-Okouma M, et al. Intravenous single administration of amiodarone and breastfeeding. Fundam Clin Pharmacol 2019;33:367–72.30471135
9 Moretti ME, Ito S, Koren G. Therapeutic drug monitoring in the lactating patient. Reprod Toxicol 1995;9:580–1. doi:10.1016/0890-6238(96)81372-4
10 Hall CM, McCormick KP. Amiodarone and breast feeding. Arch Dis Child Fetal Neonatal Ed 2003;88:F255–6.12719404
11 Watanabe C, Wachi T, Kamada S, et al. Measurement of amiodarone levels in the breast milk of a Japanese woman with peripartum cardiomyopathy. Cureus 2025;17:e89301.40909045

## Substance Identification

### Substance Name

Amiodarone

### CAS Registry Number

1951-25-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics